# Flavoxate

CASRN: 15301-69-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of flavoxate during breastfeeding. Long-term use of trihexyphenidyl might reduce milk production or milk letdown, but a single dose is not likely to interfere with breastfeeding. During long-term use, observe for signs of decreased lactation (e.g., insatiety, poor weight gain).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[1-5] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[6] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Aaron DK, Ely DG, Deweese WP, et al. (1997). Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci.
2 Powell MR, Keisler DH. (1995). A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci.
3 Daniel JA, Thomas MG, Powell MR, et al. (1997). Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci.
4 Bizzarro A, Iannucci F, Tolino A, et al. (1980). Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol.
5 Svennersten K, Nelson L, Juvnäs-Moberg K. (1992). Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand.
6 Masala A, Alagna S, Devilla L, et al. (1982). Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest.

## Substance Identification

### Substance Name

Flavoxate

### CAS Registry Number

15301-69-6

### Drug Class

Breast Feeding

Lactation

Muscarinic Antagonists

Parasympatholytics

Urological Agents